# Brincidofovir

CASRN: 444805-28-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of during breastfeeding. Until more safety data become available, an alternate drug is preferred. Individuals with smallpox are recommended to not breastfeed their infant because of the risk of passing variola virus to the infant through direct contact. Providing pumped milk to the infant may be possible if no lesions are near the breast and adequate precautions are taken with respect to cleaning hands, breasts, breast pumps and any other apparatuses used to provide milk to the infant. Individuals with Mpox should feed their infants with pasteurized donor milk or infant formula until all of their lesions are healed. Numerous other safety precautions are advised for mothers with Mpox.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Mpox) Tecovirimat

### References

1 Centers for Disease Control and Prevention. Mpox clinical care and treatment during pregnancy. January 30, 2025. https://www.cdc.gov/mpox/hcp/clinical-care/pregnancy.html

## Substance Identification

### Substance Name

Brincidofovir

### CAS Registry Number

444805-28-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents